# Levothyroxine

CASRN: 51-48-9

## Drug Levels and Effects

### Summary of Use during Lactation

Levothyroxine (T4) is a normal component of human milk. Limited data on exogenous replacement doses of levothyroxine during breastfeeding indicate no adverse effects in infants. The American Thyroid Association recommends that subclinical and overt hypothyroidism should be treated with levothyroxine in lactating women seeking to breastfeed.[1] Adequate levothyroxine treatment during lactation may normalize milk production in hypothyroid lactating mothers with low milk supply, but does not return milk lipids to normal. Mothers taking levothyroxine because of gestational hypothyroidism may have lower exclusive breastfeeding rates rates at 1 month and increased early formula supplementation.[2] Levothyroxine dosage requirement may be increased in the postpartum period compared to prepregnancy requirements in patients with Hashimoto’s thyroiditis.[3]

### Drug Levels

Although somewhat controversial, it appears that levothyroxine passes into milk poorly.[4-8] In a study of a new analytic technique, concentrations of several thyroid hormones were measured in 30 milk samples. The mean levothyroxine (T4) concentration was 94 mcg/L (range 48 to 194 mcg/L), and the mean dextrothyroxine concentration was 135 mcg/L (range 115 to 158 mcg/L). The mean liothyronine (T3) concentration was 52 mcg/L (range 32 to 109 mcg/L), and the mean reverse T3 concentration was 65 mcg/L (range 21 to 180 mcg/L). Among the 30 samples, the dextrothyroxine concentration was always higher than the levothyroxine concentration, and the reverse T3 concentration was always higher than the liothyronine concentration. The levels of levothyroxine were also higher than liothyronine levels. Several other thyroid hormones such as thyroxine; monoiodothyronine; 3,3 and 3,5-diiodothyronine were also measured.[9]

In one study, term and preterm breastmilk samples were collected monthly for 6 months from mothers of term (n = 16) or preterm (n = 15) infants. Term milk contained higher average amounts of thyroxine 11,245.5 nmol/L (8738 mcg/L) that preterm milk. 671.6 nmol/L (522 mcg/L). In the milk of preterm mothers, average thyroxine levels were 842.2 nmol/L (654 mcg/L) in the first two months of lactation compared to 595.7 nmol/L (463 mcg/L) in the 3rd through 6th month of lactation.[10]

Maternal Levels. In a study of 56 mothers with thyroid disorders, 50 had hypothyroidism and were being treated with levothyroxine; 5 mothers had controlled hyperthyroidism with no medications and 1 had hyperthyroidism treated with a medication. Milk levels of thyroid hormones were free T4 4.5 ng/L, total T4 29.6 mcg/L, free T3 2.3 ng/L and total T3 0.35 mcg/L. The average milk to serum level ratios over the period were free T4 0.32 and total T4 0.3. Levels of free and total T3 and total T4 in milk were positively correlated with their respective plasma levels.[11]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Effects of exogenous thyroid hormone administration to mothers on their infants have not been reported. One case of apparent mitigation of cretinism in hypothyroid infants by breastfeeding has been reported, but the amounts of thyroid hormones in milk are not optimal, and this result has been disputed.[12,13] The thyroid hormone content of human milk from the mothers of very preterm infants appears not to be sufficient to affect the infants’ thyroid status.[14] The amounts of thyroid hormones in milk are apparently not sufficient to interfere with diagnosis of hypothyroidism.[15]

In a telephone follow-up study, 5 nursing mothers reported taking levothyroxine (dosage unspecified). The mothers reported no adverse reactions in their infants.[16]

One mother who had undergone a thyroidectomy was taking levothyroxine 100 mcg daily as well as calcium carbonate and calcitriol. Her breastfed infant was reportedly “thriving” at 3 months of age.[17]

A woman with propionic acidemia took levothyroxine 50 mcg daily as well as biotin, carnitine, and various amino acids while exclusively breastfeeding her infant for 2 months and nonexclusively for 10 months. At that time, the infant had normal growth and development.[18]

A mother was taking sertraline and levothyroxine. She reported that her 2.5-month-old infant who was exclusively breastfed experienced a rash. The reaction was rated as possible or probable, but relatively mild.[19]

### Effects on Lactation and Breastmilk

Adequate thyroid hormone serum levels are required for normal lactation. Replacing deficient thyroid levels should improve milk production caused by hypothyroidism. Supraphysiologic doses would not be expected to further improve lactation.

The milk of women with hypothyroidism were compared to milk from women with normal thyroid function. Hypothyroid women had higher serum LDL levels than those with normal thyroid function. The milk of mothers with hypothyroidism had higher levels of docosapentaenoic acid and elaidic acid, but lower levels of tricosanoic acid than women without hypothyroidism. Many of the hypothyroid mothers were receiving levothyroxine, but many had abnormally high TSH levels.[20]

### References

1 Korevaar TIM, Leung AM, Alexander EK, . American Thyroid Association 2026 Guidelines for Thyroid Disease in Preconception, Pregnancy, and Postpartum. Thyroid 2026;36:481-544.42219800
2 Imdadoglu T, Guzel B, Okbay Gunes A, . Impact of gestational hypothyroidism on exclusive breastfeeding in the early postnatal period. Breastfeed Med 2026;21:496-503.42261710
3 Galofré JC, Haber RS, Mitchell AA, . Increased postpartum thyroxine replacement in Hashimoto’s thyroiditis. Thyroid 2010;20:901-8.20615129
4 Sato T, Suzuki Y. Presence of triiodothyronine, no detectable thyroxine and reverse triiodothyronine in human milk. Endocrinol Jpn 1979;26:507-13.499092
5 Varma SK, Collins M, Row A, . Thyroxine, tri-iodothyronine, and reverse tri-iodothyronine concentrations in human milk. J Pediatr 1978;93:803-6.712487
6 Mallol J, Obregon MJ, Morreale de Escobar GM. Analytical artifacts in radioimmunoassay of L-thyroxin in human milk. Clin Chem 1982;28:1277-82.7074933
7 Oberkotter LV, Tenore A. Separation and radioimmunoassay of T3 and T4 in human breast milk. Horm Res 1983;17:11-8.6551313
8 Koldovský O. Hormones in milk. Vitam Horm 1995;50:77-149.7709605
9 de Fátima Vélez-Pérez R, Arias-Borrego A, Velasco I, . Liquid chromatography (ion mobility) coupled to organic and inorganic mass spectrometry for determination of eight thyroid hormones in human milk with enantiomeric separation of thyroxine. Food Chem 2025;492:145542.40716411
10 Vass RA, Kiss G, Bell EF, . Thyroxine and thyroid-stimulating hormone in own mother’s milk, donor milk, and infant formula. Life (Basel) 2022;12:584.35455075
11 Zhang Q, Lian XL, Chai XF, . Relationship between maternal milk and serum thyroid hormones in patients with thyroid related diseases. Zhongguo Yi Xue Ke Xue Yuan Xue Bao 2013;35:427-31.23987491
12 Bode HH, Vanjonack WJ, Crawford JD. Mitigation of cretinism by breast-feeding. Pediatrics 1978;62:13-6.683777
13 Letarte J, Guyda H, Dussault JH, . Lack of protective effect of breast-feeding in congenital hypothyroidism: Report of 12 cases. Pediatrics 1980;65:703-5.7367075
14 van Wassenaer AG, Stulp MR, Valianpour F, . The quantity of thyroid hormone in human milk is too low to influence plasma thyroid hormone levels in the very preterm infant. Clin Endocrinol (Oxf) 2002;56:621-7.12030913
15 Abbassi V, Steinour A. Successful diagnosis of congenital hypothroidism in four breast-fed neonates. J Pediatr 1980;97:259-61.7400893
16 Ito S, Blajchman A, Stephenson M, . Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418
17 Caplan RH, Wickus GG. Reduced calcitriol requirements for treating hypoparathyroidism during lactation. A case report. J Reprod Med 1993;38:914-8.8277494
18 Mungan NÖ, Kör D, Büyükkurt S, . Propionic acidemia: A Turkish case report of a successful pregnancy, labor and lactation. J Pediatr Endocrinol Metab 2016;29:863-6.27089410
19 Morze K, Szałek E, Waszyk-Nowaczyk M. Minding the gap. Drug-related problems among breastfeeding women. Front Pharmacol 2025;16:1542269.40183105
20 Alodhaybi S, Binobaed MA, AlAnazi RH, . Impact of maternal hypothyroidism on human milk macronutrient content and fatty acid composition: A prospective cohort study. Front Nutr 2026;13:1769344.41743063

## Substance Identification

### Substance Name

Levothyroxine

### CAS Registry Number

51-48-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Thyroid Hormones